# Deferasirox

CASRN: 201530-41-8

## Drug Levels and Effects

### Summary of Use during Lactation

Deferasirox appears to pass into milk very poorly. Although Australian guidelines recommend against breastfeeding during deferasirox treatment,[1] these were published before a case report of an infant being safely breastfed by a mother with beta-thalassemia receiving deferasirox and finding of no drug in breastmilk.[2] However, since little published information is available on the use of deferasirox during breastfeeding, monitoring of the infant's serum iron is recommended.

### Drug Levels

Maternal Levels. A woman with beta-thalassemia was started on deferasirox 2250 mg (35 mg/kg) daily immediately postpartum. The drug was undetectable (<0.1 mcg/L) in a milk sample taken 2 hours after a dose.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with beta-thalassemia was started on deferasirox 2250 mg (35 mg/kg) daily immediately postpartum and exclusively breastfed her infant. Blood samples were taken from the infant at 1, 10 and 30 days postpartum. Serum ferritin levels were 190, 218, and 96 mcg/L, respectively (normal range 22 to 275 mcg/L). Serum iron levels were 101, 77 and 71 mcg/dL, respectively (normal range 60 to 170 mcg/dL). The infant's growth was normal during the first month at the 41st percentile.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Deferoxamine

### References

1 Ho PJ, Tay L, Lindeman R, et al. Australian guidelines for the assessment of iron overload and iron chelation in transfusion-dependent thalassaemia major, sickle cell disease and other congenital anaemias. Intern Med J 2011;41:516-24.21615659
2 Giampreti A, Mattioli F, Faraoni L, et al. Lactation in beta-thalassemia major: Is deferasirox compatible? The first case with clinical data and breastmilk concentrations. Clin Toxicol 2018;56:539. doi:10.1080/15563650.2018.1457818

## Substance Identification

### Substance Name

Deferasirox

### CAS Registry Number

201530-41-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Chelating Agents

Iron Chelating Agents